# Turmeric

CASRN: 8024-37-1

## Drug Levels and Effects

### Summary of Use during Lactation

Turmeric (Curcuma longa) rhizome contains curcuminoids such as curcumin. No data exist on the excretion of any components of turmeric into breastmilk. A small study found no adverse effects in infants exposed to turmeric in milk. Turmeric is "generally recognized as safe" (GRAS) as a food ingredient by the U.S. Food and Drug Administration. Turmeric is generally well tolerated even in high doses, but gastrointestinal side effects such as nausea and diarrhea, and allergic reactions have been reported. Contact dermatitis has been reported after skin contact with curcumin-containing products.[1] Turmeric may increase the risk of bleeding in patients taking warfarin and antiplatelet drugs.

Curcumin was effective for reducing postpartum depression and decreasing anxiety in one well-performed study of postpartum women.[2] Turmeric has been used as a galactogogue in India and Indonesia;[3-6] however, no scientific data support this use. In fact, curcumin suppresses milk production in lactating mammary epithelial cells in vitro.[7] Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[8,9] In Thailand it is reportedly used as part of a topical herbal mixture to shorten the time to full lactation and also part of a topical herbal mixture used for breast engorgement.[10,11] In India turmeric is a component of a paste applied to the breasts for sore nipples, and one study in Iran of moderate quality found it more effective than breastmilk for this use.[12,13] Turmeric products often contain piperine to enhance the absorption of curcuminoids. Information on piperine in breastfeeding can be found in the LactMed record on Black Pepper.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In a study of exclusively nursing mothers receiving fenugreek seed 200 mg, turmeric 100 mg and ginger 120 mg (Fenucaps; Herbal Acharn's Home Co. Ltd., Thailand) 3 times daily for 4 weeks, no adverse events were reported in their infants, although the method used to determine this finding were not reported.[14]

### Effects on Lactation and Breastmilk

A randomized study of nursing mothers with mastitis compared a cream containing curcumin (n = 32) to a placebo (n = 31) cream in the treatment of mastitis, defined as two of the following: erythema, breast tension and breast pain. Cream was applied to the affected breast 3 times daily for 3 days. Mastitis improved in both groups, but the improvement was greater in the group that received the curcumin cream.[15] The authors claimed that the study was double-blinded; however, curcumin has a bright yellow color, and no mention was made of the color of the placebo cream. This difference may have negated the blinding of the study.

Studies of Thai herbal compresses containing ginger, turmeric and camphor have evaluated the effect of application of the compresses to the breasts on lactation. The studies showed that the compresses shortened the time to lactation postpartum compared to routine clinical care for enhancing lactation.[10]

A randomized trial in women with breast engorgement compared warm compresses to warm compresses containing a mixture of dried herbs, including ginger, lemon grass, Stapf leaves and leaf sheaths, Acacia concinna leaves, tamarind leaves, Citrus hystrix (kaffir lime) peels, Blumea balsamifera (sambong) leaves, salt and camphor. Both treatments relived the pain of engorgement, but women who received the compress with herbs (n = 250) had greater pain relief than those who received the warm compress alone. Because of the possible color and odor differences between treatments, the study cannot be considered to be blinded.[11]

Fifty women in Thailand who were 1 month postpartum and exclusively breastfeeding were randomized to receive either a placebo or capsules containing fenugreek seed 200 mg, turmeric 100 mg and ginger 120 mg (Fenucaps; Herbal Acharn's Home Co. Ltd., Thailand) 3 times daily for 4 weeks. Participants pumped milk on 2 days at 0, 2 and 4 weeks of the study. The average milk volumes increased by 49% at 2 weeks and 103% at 4 weeks among participants receiving the active product. The macronutrient composition of the milk did not change in either group over the 4-week period. Growth of infants was not reported.[14]

### References

1 Chaudhari SP, Tam AY, Barr JA. Curcumin: A contact allergen. J Clin Aesthet Dermatol 2015;8:43–8.26705440
2 Hamlbar EP, Mirghafourvand M, Shaseb E, et al. The effect of curcumin on postpartum depression and anxiety in primiparous women: A double-blind randomized placebo-controlled clinical trial. BMC Complement Med Ther 2025;25:157.40281561
3 Chaudhuri RN, Ghosh BN, Chatterjee BN. Diet intake patterns of non-Bengali Muslim mothers during pregnancy and lactation. Indian J Public Health 1989;33:82–3.2641755
4 Sayed NZ, Deo R, Mukundan U. Herbal remedies used by Warlis of Dahanu to induce lactation in nursing mothers. Indian J Tradit Knowl 2007;6:602–5. https://nopr.niscpr.res.in/handle/123456789/1009
5 Sayuti NA, Atikah N. The pattern of herbal medicines use for breastfeeding mother in Jogonalan, Klaten, Indonesia: A mini survey. BMC Complement Med Ther 2023;23:399.37936188
6 Srinivas R, Eagappan K, Sasikumar S. The effect of naturally formulated galactogogue mix on breast milk production, prolactin level and short-term catch-up of birth weight in the first week of life. Int J Health Sci Res 2014;4:242–53. https://www.ijhsr.org/IJHSR_Vol.4_Issue.10_Oct2014/35.pdf
7 Kobayashi K, Tsugami Y, Suzuki N, et al. Suppressive effects of curcumin on milk production without inflammatory responses in lactating mammary epithelial cells. Phytomedicine 2020;80:153360.33038867
8 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307–14.29902083
9 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42–e53.33481531
10 Dhippayom T, Kongkaew C, Chaiyakunapruk N, et al. Clinical effects of Thai herbal compress: A systematic review and meta-analysis. Evid Based Complement Alternat Med 2015;2015:942378.25861373
11 Ketsuwan S, Baiya N, Paritakul P, et al. Effect of herbal compresses for maternal breast engorgement at postpartum: A randomized controlled trial. Breastfeed Med 2018;13:361–5.29688768
12 Amuthavalluvan V, Devarapalli J. Indigenous knowledge and health seeking behavior among Kattunayakan: A tribe in transition. Glob J Human Soc Sci 2011;11:19–23. http://socialscienceresearch.org/index.php/GJHSS/article/view/198/161
13 Pezeshki B, Pouredalati M, Zolala S, et al. Comparison of the effect of aloe vera extract, breast milk, calendit-E, curcumin, lanolin, olive oil, and purslane on healing of breast fissure in lactating mothers: A systematic review. International Journal of Pediatrics (Mashhad) 2020;8:10853–63. doi:10.22038/ijp.2020.46125.3760
14 Bumrungpert A, Somboonpanyakul P, Pavadhgul P, et al. Effects of fenugreek, ginger, and turmeric supplementation on human milk volume and nutrient content in breastfeeding mothers: A randomized double-blind controlled trial. Breastfeed Med 2018;13:645–50.30411974
15 Afshariani R, Farhadi P, Ghaffarpasand F, et al. Effectiveness of topical curcumin for treatment of mastitis in breastfeeding women: A randomized, double-blind, placebo-controlled clinical trial. Oman Med J 2014;29:330–4.25337308

## Substance Identification

### Substance Name

Turmeric

### Scientific Name

Curcuma longa

### CAS Registry Number

8024-37-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Food

Phytotherapy

Plant Extracts

Galactogogues